# Bismuth Subsalicylate

CASRN: 14882-18-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the possibility of absorption of salicylate from the breastmilk by the infant, alternate therapies are preferred.[1]

### Drug Levels

Maternal Levels. No published information was found on the use of bismuth subsalicylate during breastfeeding. Infant salicylate intake is estimated to be less than 1% of the maternal dose when both drug and metabolite are considered.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One case report of metabolic acidosis was caused by salicylate in a 16-day old breastfed infant whose mother was taking aspirin 650 mg every 4 hours for arthritis.[3] However, there was no measurement of salicylate in maternal serum or milk and it is unclear whether the infant had received any salicylate directly.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Diarrhea) Loperamide; (Heartburn) Antacids, Famotidine, Nizatidine, Omeprazole, Pantoprazole

### References

1 Lewis JH, Weingold AB and the Committee of FDA-Related Matters American College of Gastroenterology. The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol 1985;80:912-23.2864852
2 Levy G. Salicylate pharmacokinetics in the human neonate. In: Morselli P, Garattini S, Sereni F, eds. Basic and therapeutic aspects of perinatal pharmacology. New York: Raven Press; 1975:319-30.
3 Clark JH, Wilson WG. A 16-day-old breast-fed infant with metabolic acidosis caused by salicylate. Clin Pediatr (Phila) 1981;20:53-4.7449246

## Substance Identification

### Substance Name

Bismuth Subsalicylate

### CAS Registry Number

14882-18-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Bismuth

Salicylates

Gastrointestinal Agents